# Loperamide

CASRN: 53179-11-6

## Drug Levels and Effects

### Summary of Use during Lactation

The amount of loperamide that enters milk from a prodrug of loperamide is minimal. Use of loperamide during breastfeeding is unlikely to affect the infant with standard doses.[1,2]

### Drug Levels

Maternal Levels. Loperamide has not been studied during breastfeeding, but the loperamide prodrug, loperamide oxide, has been studied in a dosage of 2 doses of 4 mg given 12 hours apart to 6 women 18 to 47 hours after delivery. Median loperamide milk concentrations were 0.18 mcg/L at 12 hours after the first dose, 0.27 mcg/L at 6 hours after the second dose, and 0.19 mcg/L at 24 hours after the second dose.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mahadevan U, Kane S. American Gastroenterological Association Institute Technical Review on the Use of Gastrointestinal Medications in Pregnancy. Gastroenterology 2006;131:283-311.16831611
2 Schulze H, Esters P, Dignass A. Review article: The management of Crohn's disease and ulcerative colitis during pregnancy and lactation. Aliment Pharmacol Ther 2014;40:991-1008.25200000
3 Nikodem VC, Hofmeyr GJ. Secretion of the antidiarrhoeal agent loperamide oxide in breast milk. Eur J Clin Pharmacol 1992;42:695-6.1623917

## Substance Identification

### Substance Name

Loperamide

### CAS Registry Number

53179-11-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidiarrheals

Gastrointestinal Agents